# Fluorometholone

CASRN: 426-13-1

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the ophthalmic use of fluorometholone during breastfeeding. Because absorption from the eye is limited, ophthalmic fluorometholone would not be expected to cause any adverse effects in breastfed infants. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Prednisolone

## Substance Identification

### Substance Name

Fluorometholone

### CAS Registry Number

426-13-1

### Drug Class

- Breast Feeding
- Lactation
- Anti-Inflammatory Agents
- Corticosteroids, Ophthalmic
- Glucocorticoids